# Losartan

CASRN: 114798-26-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of losartan during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Captopril, Benazepril, Enalapril, Lisinopril, Quinapril, Valsartan

## Substance Identification

### Substance Name

Losartan

### CAS Registry Number

114798-26-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin II Type 1 Receptor Blockers